# Delamanid

CASRN: 681492-22-8

## Drug Levels and Effects

### Summary of Use during Lactation

Delamanid is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. No information is available on the clinical use of delamanid during breastfeeding. Preliminary evidence indicates that delamanid and its active metabolite are present in milk at low levels. Delamanid is usually given with several other drugs for resistant tuberculosis, so the clinical importance of these small amounts is unclear.

### Drug Levels

Maternal Levels. The breastmilk of two patients receiving delamanid in unspecified doses had peak delamanid milk levels 4 hours after a dose. One had a peak delamanid milk level of about 200 mcg/L and a level of the active metabolite DM-6705 that was undetectable (<10 mcg/L) at all time points. The second woman had a peak delamanid level of about 700 mcg/L and a peak milk level of the active metabolite DM-6705 of about 40 mcg/L at 4 hours after the dose. Because the serum level of the first patient was also low, it was thought that her adherence to the regimen was poor.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mkhize B, Court R, Castel S, et al. Validation and application of an online extraction and liquid chromatography tandem mass spectrometry assay for the analysis of delamanid and its DM-6705 metabolite in human breast milk. J Pharm Biomed Anal 2024;246:116225.38761519

## Substance Identification

### Substance Name

Delamanid

### CAS Registry Number

681492-22-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antitubercular Agents